# Ginseng

CASRN: 50647-08-0; 92347-06-3

## Drug Levels and Effects

### Summary of Use during Lactation

The roots of American ginseng (Panax quinquefolius), Asian ginseng (Panax ginseng), and several other species contain steroidal saponins called ginsenosides that are purported to be adaptogens (i.e., to increase endurance and improve memory). Ginseng has no specific uses during breastfeeding. Ginseng is generally well tolerated in adults and is "generally recognized as safe" (GRAS) by the U.S. Food and Drug Administration. The most common side effects include headache, hypertension, diarrhea, sleeplessness, skin rash, and vaginal bleeding. Ginseng decreases the blood levels of some drugs, such as warfarin, and enhances the effect of sedating drugs. With long-term use, nervousness, diarrhea, confusion, depression or depersonalization may occur. Gynecomastia and breast pain have been reported.[1,2] No data exist on the safety and efficacy of ginseng in nursing mothers or infants. Because of its possible estrogenic activity and lack of information during breastfeeding, many sources recommend that ginseng not be used during lactation.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Coon JT, Ernst E. (2002). Panax ginseng: A systematic review of adverse effects and drug interactions. Drug Saf.
2 Seely D, Dugoua JJ, Perri D, et al. (2008). Safety and efficacy of Panax ginseng during pregnancy and lactation. Can J Clin Pharmacol.

## Substance Identification

### Substance Name

Ginseng

### Scientific Name

Panax ginseng; Panax quinquefolius

### CAS Registry Number

50647-08-0; 92347-06-3

### Drug Class

Breast Feeding

Lactation

Complementary Therapies

Phytotherapy

Plants, Medicinal